# Tinzaparin

## Drug Levels and Effects

### Summary of Use during Lactation

Tinzaparin is no longer available in the US. Although tinzaparin has not been studied, other low molecular weight heparins (e.g., dalteparin, enoxaparin) are not excreted into breastmilk in clinically relevant amounts. Tinzaparin is acceptable to use during breastfeeding.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acenocoumarol, Dalteparin, Enoxaparin, Heparin, Rivaroxaban, Warfarin

### References

1 Bates SM, Rajasekhar A, Middeldorp S, et al. (2018). American Society of Hematology 2018 guidelines for management of venous thromboembolism: Venous thromboembolism in the context of pregnancy. Blood Adv.

## Substance Identification

### Substance Name

Tinzaparin

### Drug Class

Breast Feeding

Lactation

Anticoagulants

Low Molecular Weight Heparin